# Thiothixene

CASRN: 5591-45-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with thiothixene during breastfeeding, other antipsychotic agents are preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Thiothixene has caused galactorrhea.[1] Hyperprolactinemia appears to be the cause of the galactorrhea.[2-4] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[5] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Kahn JL. More on galactorrhea associated with molindone. Am J Psychiatry 1979;136:1617-8 574364
2 Turkington RW. Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med 1972;130:349-54 4560178
3 Turkington RW. Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab 1972;34:62-6 5061776
4 Meltzer HY, Fang VS. The effect of neuroleptics on serum prolactin in schizophrenic patients. Arch Gen Psychiatry 1976;33:279-86 1259521
5 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62 11913677

## Substance Identification

### Substance Name

Thiothixene

### CAS Registry Number

5591-45-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Thioxanthines